# Rufinamide

CASRN: 106308-44-5

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of rufinamide during breastfeeding and because it is potentially toxic to the breastfed infant, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Rufinamide

### CAS Registry Number

106308-44-5

### Drug Class

- Breast Feeding
- Lactation
- Anticonvulsants